# Sulfur

CASRN: 7704-34-9

## Drug Levels and Effects

### Summary of Use during Lactation

Sulfur 5% to 10% in a petrolatum base is safe for topical use in children, including infants under 2 months of age.[1] This makes it a useful alternative to organic insecticides for treating scabies in nursing mothers; however, the petrolatum base makes undesirable for use on the breast.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Centers for Disease Control and Prevention. Clinical care of scabies.https://www.cdc.gov/scabies/hcp/clinical-care/

## Substance Identification

### Substance Name

Sulfur

### CAS Registry Number

7704-34-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Infective Agents

Antiparasitic Agents